# Iloprost

CASRN: 78919-13-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of iloprost during breastfeeding. The half-life of iloprost is 20 to 30 minutes and iloprost is generally not detectable in plasma 30 to 60 minutes after inhalation. It is unlikely that clinically important amounts of iloprost are excreted into milk after 1 hour following an inhaled dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Pulmonary Artery Hypertension) Bosentan, Epoprostenol, Nitric Oxide, Sildenafil, Treprostinil

## Substance Identification

### Substance Name

Iloprost

### CAS Registry Number

78919-13-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Cardiovascular Agents

Prostaglandins, Synthetic

Vasodilator Agents